# Daptomycin

CASRN: 103060-53-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited and somewhat inconsistent information indicates that daptomycin produces very low levels in milk and it would not be expected to cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. A nursing mother received intravenous daptomycin 500 mg (6.7 mg/kg) and ertapenem 1 gram once daily for 28 days to treat a pelvic infection. On day 27 of therapy, expressed breastmilk was collected over six 4-hour intervals. Daptomycin milk concentrations were highest in the second sample with a concentration of 44.7 mcg/L. The fifth sample, ending at 20 hours after the dose, contained 29.2 mcg/L of daptomycin and the final sample had no detectable drug (<25 mcg/L).[1] Using the average maximum milk level, the infant would receive a weight-adjusted dosage of 0.1% of the maternal dosage.

A woman nursing a newborn was given daptomycin 500 mg (7.4 mg/kg) intravenously once daily for 14 days for a soft tissue infection. Hindmilk samples were taken during the last 4 days of therapy and for 2 days after the last dose. Trough daptomycin levels taken during therapy averaged 208 mcg/L. Levels of about 270 mcg/L were found at 6 and 12 hours after one of the doses. The highest concentration in milk was at 78 h after the eleventh dose, with a concentration of 329 mcg/L. After the last dose, milk levels dropped from 330 mcg/L to 121 mcg/L over a period of 42 hours. Using the median milk level, the infant would receive a dose of 36.5 mcg/kg daily or a weight-adjusted dosage of 0.5% of the maternal dosage.[2,3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother nursing (extent not stated) a 5-month-old infant received intravenous daptomycin 500 mg and ertapenem 1 gram once daily for 28 days to treat a pelvic infection. No adverse events were noted in the infant during the treatment or follow-up examination.[1]

A woman nursing a newborn was given daptomycin 500 mg intravenously once daily for 14 days. No adverse effects were noted in the infant during therapy and for 7 days after the end of therapy.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Vancomycin

### References

1 Buitrago MI, Crompton JA, Bertolami S, et al. (2009). Extremely low excretion of daptomycin into breast milk of a nursing mother with methicillin-resistant Staphylococcus aureus pelvic inflammatory disease. Pharmacotherapy.
2 Cesari E, Roda G, Visconti GL, et al. (2018). Daptomycin excretion into human milk. Br J Clin Pharmacol.
3 Dei Cas M, Casagni E, Gambaro V, et al. (2019). Determination of daptomycin in human plasma and breast milk by UPLC/MS-MS. J Chromatogr B Analyt Technol Biomed Life Sci.

## Substance Identification

### Substance Name

Daptomycin

### CAS Registry Number

103060-53-3

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antibacterial Agents

Peptides, Cyclic

Lipopeptides